# Nitrogen-13

CASRN: 13981-22-1

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of nitrogen-13 radiopharmaceuticals as diagnostic agents. International guidelines state that breastfeeding need not be interrupted after administration of radiopharmaceuticals containing nitrogen-13.[1,2]

### Drug Levels

Nitrogen N 13 decays by positron emission, emitting gamma photon with an energy of 511 keV. It has a physical half-life of 9.96 minutes.[2]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Mattsson S, Johansson L, Leide Svegborn S, et al. Radiation dose to patients from radiopharmaceuticals: A compendium of current information related to frequently used substances. ICRP Publication 128. Annex D. Recommendations on breast-feeding interruptions. Ann ICRP 2015;44:7-321.26069086
2 Dilsizian V, Metter D, Palestro C, Zanzonico P. Advisory Committee on Medical Uses of Isotopes (ACMUI) Sub-Committee on Nursing Mother Guidelines for the Medical Administration of Radioactive Material. Final report submitted: January 31, 2019. 2019. https://www.nrc.gov/docs/ML1903/ML19038A498.pdf

## Substance Identification

### Substance Name

Nitrogen-13

### CAS Registry Number

13981-22-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Nitrogen Radioisotopes

Diagnostic Agents